# Tecovirimat

CASRN: 869572-92-9

## Drug Levels and Effects

### Summary of Use during Lactation

Information from one patient indicates that milk levels of tecovirimat are low, consistent with relatively high protein binding and low oral absorption. Additionally, tecovirimat is approved for use in pediatric patients weighing as little as 3 kg. Amounts in breastmilk are unlikely to adversely affect the breastfed infant. Tecovirimat is considered to be the drug of choice for treating Mpox during lactation. Individuals with Mpox should feed their infants with pasteurized donor milk or infant formula until all of their lesions are healed. Numerous other safety precautions are advised for mothers with Mpox.[1] Individuals with smallpox are recommended not to breastfeed their infant because of the risk of passing variola virus to the infant through direct contact.

### Drug Levels

Maternal Levels. A women was diagnosed with Mpox after viral DNA was detected in maternal blood, urine, breastmilk, vaginal, pharyngeal, and lesion swabs. Tecovirimat was given at a dosage of 600 mg twice daily for 14 days. Breast milk samples were obtained by manual expression before a dose, and 3, 5, and 7 hours after the dose on day 13 of treatment. The predose concentration was used as the 12-hour result and AUC_0-12_ of tecovirimat was calculated by the trapezoidal method. The predose concentration was 99.1 mcg/L, with a peak concentration of 227.2 mcg/L occurring at 7 hours after the dose. Using the AUC_0–12_ of 2028 hours per ng/mL, a mean value of 169 mcg/L was calculated, which would result in a daily infant dosage of 50.7 mcg/kg daily. Assuming a maternal weight of 70 kg, the relative infant dosage would be 0.99%.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Centers for Disease Control and Prevention. Mpox clinical care and treatment during pregnancy. January 30, 2025https://www.cdc.gov/mpox/hcp/clinical-care/pregnancy.html
2 Colavita F, Tempestilli M, Meschi S, et al. Mpox virus in human breastmilk and tecovirimat pharmacokinetics: Implications for postnatal transmission. Lancet Infect Dis 2026;26:e211–e2.41965240

## Substance Identification

### Substance Name

Tecovirimat

### CAS Registry Number

869572-92-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents